# Eravacycline

CASRN: 1207283-85-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of eravacycline during breastfeeding. The manufacturer states that breastfeeding is not recommended during treatment and for 4 days after the last dose. However, available literature indicates that there is not likely to be harm in short-term use of eravacycline during lactation because the drug is 79 to 90% bound to plasma proteins, so milk levels are likely low and absorption by the infant is likely inhibited by the calcium in breastmilk. Although the manufacturer recommends avoiding breastfeeding during administration of eravacycline and for 4 days after the last dose, short-term use of eravacycline is probably acceptable in nursing mothers. If an infant is breastfed, monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (e.g., thrush, diaper rash) or rarely, blood in the stool indicating possible antibiotic-associated colitis. As a theoretical precaution, avoid prolonged or repeat courses during nursing.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Eravacycline

### CAS Registry Number

1207283-85-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Tetracyclines